# Besifloxacin

CASRN: 141388-76-3

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Maternal use of besifloxacin eye drops presents negligible risk for the nursing infant. To substantially diminish the amount of drug that reaches the breastmilk after using eye drops, place pressure over the tear duct by the corner of the eye for 1 minute or more, then remove the excess solution with an absorbent tissue.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Ophthalmic) Ciprofloxacin, Levofloxacin, Ofloxacin

## Substance Identification

### Substance Name

Besifloxacin

### CAS Registry Number

141388-76-3

### Drug Class

- Breast Feeding
- Lactation
- Fluoroquinolones
- Quinolones